# Prucalopride

CASRN: 179474-81-8

## Drug Levels and Effects

### Summary of Use during Lactation

No published experience exists with prucalopride during breastfeeding. However, the manufacturer reports an unpublished study that indicates a relatively low amount of drug in breastmilk. Until more data become available, monitor the breastfed infant for diarrhea.

### Drug Levels

Maternal Levels. The manufacturer reports an unpublished study in 8 healthy lactating women who were weaning their infants and given prucalopride 2 mg daily for 4 days. Plasma and milk samples were collected at predose (day 1 and 4), and at 2, 4, 8, 12, and 24 hours after the dose on day 4. The dose to the breastfed infant was estimated to be 1.74 mcg/kg daily, which is about 6% of the weight-adjusted maternal dose.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Linaclotide, Lubiprostone, Plecanatide, Psyllium

## Substance Identification

### Substance Name

Prucalopride

### CAS Registry Number

179474-81-8

### Drug Class

Breastfeeding

Lactation

Gastrointestinal Agents

Laxatives

Serotonin 5-HT4 Receptor Agonists